# Insulin

CASRN: 11061-68-0

## Drug Levels and Effects

### Summary of Use during Lactation

Mothers with diabetes using insulin may nurse their infants. Exogenous insulin is excreted into breastmilk, including newer biosynthetic insulins (e.g., aspart, deglutec, detemir, glargine glulisine, lispro). Even direct administration of recombinant insulin orally to preterm infants is safe.[1] Insulin is a normal component of breastmilk and may decrease the risk of type 1 diabetes in breastfed infants.[2-5] Women taking insulin for type 2 diabetes have higher milk insulin levels than those controlled with diet alone.[6]

Insulin requirements are reduced postpartum in women with type 1 diabetes,[7,8] although postpartum insulin requirements do not significantly differ between breastfeeding and non-breastfeeding women.[9] In general, insulin requirements are 30% to 50% lower than prepregnancy dosages immediately postpartum. Then the insulin requirements during breastfeeding average 21% lower than prepregnancy dosages, but there is wide variation.[8,10] In one study, insulin requirements were lower than prepregnancy dosage only during the first week postpartum: 54% of prepregnancy dosage on day 2 and 73% on day 3 postpartum. On day 7 postpartum, insulin dosage returned to prepregnancy requirements.[11] Another study found that dosage requirements did not return to normal for up to 6 weeks in some mothers.[12] A third study found that at 4 months postpartum, patients with type 1 diabetes who exclusively breastfed had an average of 13% lower (range −52% to +40%) insulin requirement than their prepregnancy requirement.[13] A retrospective case-control study found a 34% decrease in postpartum insulin requirement compare to preconception values. There was a nonsignificant trend towards lower requirements in exclusively breastfeeding mothers compared to partial or full formula feeding.[6] A small study found that mothers on insulin pumps were found to have an average basal insulin rates 14% lower and carbohydrate-to-insulin ratios were 10% higher than pre-pregnancy settings.[14] Breastfeeding appears to improve glucose postpartum glucose tolerance in mothers with gestational diabetes mellitus and in normal women.[15-17]

A small, well-controlled study of women with type 1 diabetes mellitus using continuous subcutaneous insulin found that the average basal insulin requirement in women with type 1 diabetes who breastfed was 0.21 units/kg daily and the total insulin requirement was 0.56 units/kg daily. In similar women who did not breastfeed, the basal insulin requirement was 0.33 units/kg daily and the total insulin requirement was 0.75 units/kg daily. The 36% lower basal insulin requirement was thought to be caused by glucose use for milk production.[18]

Lactation onset occurs later in patients with type 1 diabetes than in women without diabetes, with a greater delay in mothers with poor glucose control.[11,19] Mothers with type 1 diabetes also discontinue nursing at a higher rate during the first week postpartum.[20-22] Women with any form of diabetes during pregnancy had more problems with low milk supply than women without diabetes.[23] Once established, lactation persists as long in mothers with diabetes as in mothers without diabetes.[19,24] However, as in women without diabetes, smoking has a strong negative impact on lactation among mothers with type 1 diabetes.[13,25] Other factors that have been identified as causes of shorter duration of breastfeeding among type 1 diabetic patients are more frequent caesarean sections and earlier delivery.[26] Among patients with gestational diabetes, those treated with insulin have a delayed onset of lactogenesis II and lower exclusive breastfeeding rates compared to those not treated with insulin.[27,28]

### Drug Levels

Maternal Levels. Insulin is normally present in breastmilk.[29,30] In one study, insulin levels in milk were 60 milliunits/L (range 6.5 to 306 milliunits/L) in 42 mothers without diabetes who had fullterm infants between 3 and 30 days postpartum.[2] Insulin levels averaged 59 milliunits/L on day 3 postpartum and 40 milliunits/L on day 7 postpartum in 24 mothers without diabetes who had fullterm infants. Mothers of preterm infants had nonsignificant changes in milk insulin levels.[31]

In a study of 7 diabetic nursing mothers and 10 nondiabetic nursing mothers, blood glucose was elevated to about 300 mg/dL using a continuous intravenous glucose infusion. Regular pork insulin was then given intravenously to lower the blood glucose. Glucose and insulin were measured in the breastmilk of all the mothers. The milk glucose of women with diabetes approximately tripled during the experiment, but milk glucose remained low in the nondiabetic women. Milk insulin was elevated in the diabetic women, with the peak milk insulin level occurring between 30 to 50 minutes after the intravenous injection. Nine of the 10 nondiabetic women had detectable insulin levels in breastmilk which ranged from 5.1 to 13 milli-IU/mL.[32]

Insulin was measured in donor milk from 34 nondiabetic women who were between 1 month and 1 year postpartum. The average insulin concentration was 163 picomoles/L. After pasteurization using the Holder method (62.5 degrees C for 30 min), the average concentration was 88 picomoles/L.[33]

A small study measured breastmilk insulin concentrations in control mothers (n = 5; 1 to 6 months postpartum), mothers with type 1 diabetes mellitus (n = 4; 2 to 5 months postpartum) and type 2 diabetes (n = 5; 5 to 6 months postpartum). No differences were found in the insulin content among the 3 groups and little circadian variation was found. Mothers with type 1 diabetes were well controlled on insulin aspart and insulin glargine. No endogenous insulin was found in their breastmilk, but the milk of 3 of the mothers contained an average of 20.5 milliunits/L of insulin, presumed to be of exogenous origin. No indication of paracellular diffusion of insulin was apparent in these women and C-peptide levels in milk were only 5 to 7% those of control mothers. These findings indicate that insulin is likely actively transported into breastmilk.[34]

A cohort study compared insulin levels in the breastmilk of mothers who had normal weight and those who were overweight or obese. Breastmilk insulin concentrations were higher in the overweight and obese mothers at 2 weeks, 1 month and 3 months postpartum. The average milk insulin concentration was almost twice as great as fasting insulin serum insulin in one study at 2 weeks postpartum and a third higher at 4 months postpartum.[35]

A study compared milk insulin levels in mothers who either had type 2 diabetes controlled with insulin with or without oral agents, women whose glucose was controlled by diet alone or women without diabetes. The group receiving insulin had higher milk insulin levels than the other two groups and their milk insulin increased as mean nocturnal serum glucose increased.[6]

A study of the milk of the mothers of preterm infants found insulin levels to average 86.4 pmol/L in the first 2 months postpartum and 119.1 pmol/L in months 3 to 6 postpartum, which was a statistically significant difference. The average concentration of insulin in preterm milk was 109.1 pmol/L over the first 6 months postpartum compared to 96.7 pmol/L in the milk of fullterm milk, although this difference was not statistically significant.[36]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date. Insulin in breastmilk is thought to be necessary for intestinal maturation of the infant and may help decrease the risk of contracting type 1 diabetes in breastfed infants.[2,3]

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 3 unspecified serious adverse reactions reported in breastfed infants associated with insulin glargine. Further details of the cases were not reported.[37]

### Effects on Lactation and Breastmilk

Proper insulin levels are necessary for lactation. Good glycemic control enhances maternal serum and milk prolactin concentrations and decreases the delay in the establishment of lactation that can occur in mothers with type 1 diabetes.[19,38]

One-hundred two of 107 consecutive mothers with type 1 diabetes mellitus who delivered were followed at a Danish hospital. Mothers were given prenatal information on breastfeeding and were offered postnatal counseling by a nurse on the benefits of breastfeeding. All infants were admitted to the neonatal intensive care unit at about 2 hours of age for the following 24 hours. When possible, mothers either breastfed or pumped milk for their infants during this time. Mothers were contacted at 5 days and 4 months postpartum to determine their breastfeeding status. The rates of initiation of exclusive and nonexclusive breastfeeding and exclusive formula feeding and the rates at 4 months postpartum were no different from those of the Danish population.[13]

Eight hundred eighty-three women with gestational diabetes were interviewed at 6 to 9 weeks postpartum. Those who had been treated with insulin more frequently reported having a delayed onset of lactogenesis II (>72 hours) postpartum than those not treated with insulin, independent of other maternal risk factors. The odds ratio of having delayed lactogenesis II was 3.1 among insulin-treated mothers compared to mothers with gestational diabetes who did not receive insulin.[27]

A small, controlled trial of women with gestational diabetes compared those treated with insulin to women treated with diet and exercise. Those treated with insulin had a lower rate of exclusive breastfeeding than those treated with diet and exercise (57% vs 81%).[28]

### References

1 Mank E, Sáenz de Pipaón M, Lapillonne A, . Efficacy and safety of enteral recombinant human insulin in preterm infants: A randomized clinical trial. JAMA Pediatr 2022;176:452-60.35226099
2 Shehadeh N, Gelertner L, Blazer S, . Importance of insulin content in infant diet: Suggestion for a new infant formula. Acta Paediatr 2001;90:93-5.11227343
3 Shehadeh N, Shamir R, Berant M, . Insulin in human milk and the prevention of type 1 diabetes. Pediatr Diabetes 2001;2:175-7.15016183
4 Tiittanen M, Paronen J, Savilahti E, . Dietary insulin as an immunogen and tolerogen. Pediatr Allergy Immunol 2006;17:538-43.17014631
5 Mank E, van Toledo L, Heijboer AC, . Insulin concentration in human milk in the first ten days postpartum: Course and associated factors. J Pediatr Gastroenterol Nutr 2021;73:e115-e9.34183615
6 Rodel RL, Farabi SS, Hirsch NM, . Human milk imparts higher insulin concentration in infants born to women with type 2 diabetes mellitus. J Matern Fetal Neonatal Med 2021;35:7676-84.34465258
7 Roeder HA, Moore TR, Ramos GA. Changes in postpartum insulin requirements for patients with well-controlled type 1 diabetes. Am J Perinatol 2016;33:683-7.26862721
8 Ringholm L, Stougaard EB, Nørgaard SK, . Diabetes management during breastfeeding in women with type 1 diabetes. Curr Diab Rep 2020;20:34.32562097
9 Skajaa GØ, Kampmann U, Ovesen PG, . Breastfeeding and insulin requirements in women with type 1 diabetes mellitus in the first year postpartum. Acta Diabetol 2023;60:899-906.36991223
10 Kakoulidis I, Ilias I, Linardi A, . Insulin requirements during lactation in women with diabetes mellitus type 1 in comparison with pre-pregnancy levels: A 10-year retrospective study. Health Care Women Int 2022;43:309-12.34586960
11 Stanley K, Fraser R, Bruce C. Physiological changes in insulin resistance in human pregnancy: Longitudinal study with the hyperinsulinaemic euglycemic clamp technique. Br J Obstet Gynaecol 1998;105:756-9.9692417
12 Davies HA, Clark JD, Dalton KJ, . Insulin requirements of diabetic women who breast feed. BMJ 1989;298:1357-8.2502253
13 Stage E, Norgard H, Damm P, . Long-term breast-feeding in women with type 1 diabetes. Diabetes Care 2006;29:771-4.16567813
14 Nørgaard SK, Nørgaard K, Roskjær AB, . Insulin pump settings during breastfeeding in women with type 1 diabetes. Diabetes Technol Ther 2020;22:314-20.31580150
15 O’Reilly MW, Avalos G, Dennedy MC, . Atlantic DIP: high prevalence of abnormal glucose tolerance post partum is reduced by breast-feeding in women with prior gestational diabetes mellitus. Eur J Endocrinol 2011;165:953-9.21937504
16 Gunderson EP, Hedderson MM, Chiang V, . Lactation intensity and postpartum maternal glucose tolerance and insulin resistance in women with recent GDM: The SWIFT cohort. Diabetes Care 2012;35:50-6.22011407
17 Da Costa TH, Bluck LJ. High lactation index is associated with insulin sensitivity. J Nutr Biochem 2011;22:446-9.20655718
18 Riviello C, Mello G, Jovanovic LG. Breastfeeding and the basal insulin requirement in type 1 diabetic women. Endocr Pract 2009;15:187-93.19364685
19 Neubauer SH, Ferris AM, Chase CG, . Delayed lactogenesis in women with insulin-dependent diabetes mellitus. Am J Clin Nutr 1993;58:54-60.8317390
20 Ferris AM, Dalidowitz CK, Ingardia CM, . Lactation outcome in insulin-dependent diabetic women. J Am Diet Assoc 1988;88:317-22.3279099
21 Hummel S, Winkler C, Schoen S, . Breastfeeding habits in families with type 1 diabetes. Diabet Med 2007;24:671-6.17403118
22 Finkelstein SA, Keely E, Feig DS, . Breastfeeding in women with diabetes: Lower rates despite greater rewards. A population-based study. Diabet Med 2013;30:1094-101.23692476
23 Riddle SW, Nommsen-Rivers LA. A case control study of diabetes during pregnancy and low milk supply. Breastfeed Med 2016;11:80-5.26859784
24 Schoen S, Sichert-Hellert W, Hummel S, . Breastfeeding duration in families with type 1 diabetes compared to non-affected families: results from BABYDIAB and DONALD studies in Germany. Breastfeed Med 2008;3:171-5.18778212
25 Knudsen A, Pedersen H, Klebe JG. Impact of smoking on the duration of breastfeeding in mothers with insulin-dependent diabetes melllitus. Acta Paediatr 2001;90:926-30.11529544
26 Sorkio S, Cuthbertson D, Barlund S, . Breastfeeding patterns of mothers with type 1 diabetes: results from an infant feeding trial. Diabetes Metab Res Rev 2010;26:206-11.20474068
27 Matias SL, Dewey KG, Quesenberry CP, Jr, . Maternal prepregnancy obesity and insulin treatment during pregnancy are independently associated with delayed lactogenesis in women with recent gestational diabetes mellitus. Am J Clin Nutr 2014;99:115-21.24196401
28 de Souza PC, da Silva AGA, Santos CMAM, . Comparison of perinatal outcomes of women with gestational diabetes mellitus according to type of treatment for glycemic control. J Pediatr (Rio J) 2024;101:179-86.39362638
29 Kulski JK, Hartmann PE. Milk insulin, GH and TSH: Relationship to changes in milk lactose, glucose and protein during lactogenesis in women. Endocrinol Exp 1983;17:317-26.6360660
30 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77-149.7709605
31 Shehadeh N, Khaesh-Goldberg E, Shamir R, . Insulin in human milk: Postpartum changes and effect of gestational age. Arch Dis Child Fetal Neonatal Ed 2003;88:F214-6.12719395
32 Jovanovic-Peterson L, Fuhrmann K, Hedden K, . Maternal milk and plasma glucose and insulin levels: Studies in normal and diabetic subjects. J Am Coll Nutr 1989;8:125-31.2651503
33 Ley SH, Hanley AJ, Stone D, . Effects of pasteurization on adiponectin and insulin concentrations in donor human milk. Pediatr Res 2011;70:278-81.21587097
34 Whitmore TJ, Trengove NJ, Graham DF, . Analysis of insulin in human breast milk in mothers with type 1 and type 2 diabetes mellitus. Int J Endocrinol 2012;2012:296368.22500167
35 Young BE, Patinkin Z, Palmer C, . Human milk insulin is related to maternal plasma insulin and BMI: But other components of human milk do not differ by BMI. Eur J Clin Nutr 2017;71:1094-100.28513622
36 Vass RA, Bell EF, Roghair RD, . Insulin, testosterone, and albumin in term and preterm breast milk, donor milk, and infant formula. Nutrients 2023;15:1476.36986206
37 Heerfordt IM, Gotfredsen DR, Horwitz H, . EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431-6.40190021
38 Ostrom KM, Ferris AM. Prolactin concentrations in serum and milk of mothers with and without insulin-dependent diabetes mellitus. Am J Clin Nutr 1993;58:49-53.8317389

## Substance Identification

### Substance Name

Insulin

### CAS Registry Number

11061-68-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents